# Hepatitis A Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to the hepatitis A vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[1,2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478

## Substance Identification

### Substance Name

Hepatitis A Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines